# Zanamivir

CASRN: 139110-80-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of zanamivir during breastfeeding. One group of authors estimated that an exclusively breastfed 5 kg infant would receive about 0.075 mg daily in breastmilk after an inhaled maternal dose of 10 mg, which is less than 1% of the dose in older children. In addition, because zanamivir is poorly absorbed orally, it is not likely to reach the bloodstream of the infant in clinically important amounts.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Oseltamivir

### References

1 Tanaka T, Nakajima K, Murashima A, et al. (2009). Safety of neuraminidase inhibitors against novel influenza A (H1N1) in pregnant and breastfeeding women. CMAJ.

## Substance Identification

### Substance Name

Zanamivir

### CAS Registry Number

139110-80-8

### Drug Class

Breast Feeding

Lactation

Antiviral Agents

Neuraminidase Inhibitors